# Axicabtagene Ciloleucel

## Drug Levels and Effects

### Summary of Use during Lactation

There are no reports of breastfeeding during CAR-T cell therapy. Some information on the use of axicabtagene ciloleucel for CAR T-cell therapy indicates that CAR T-cells can persist and be found in breastmilk as long as 5+ years after therapy. However, two infants have been breastfed to some extent after maternal therapy. One was extensively followed-up and developed normally. If breastfeeding is attempted following axicabtagene ciloleucel CAR T-cell therapy, infants should be monitored carefully, particularly with B- and T-cell counts and immunoglobulin (IgA, IgG and IgM) blood levels.

### Drug Levels

Maternal Levels. A 35-year-old woman with diffuse large B-cell lymphoma received axicabtagene ciloleucel CAR T-cell therapy and achieved metabolic complete response. Five years later she became pregnant and delivered a healthy infant. Follow-up blood tests demonstrated persistent CAR T-cells with confirmation on T-cell clonality screening. Her breastmilk had detectable CAR T-cells.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Two mothers who received CAR-T cell therapy, one for transformed follicular lymphoma and the other for large B-cell lymphoma. One mother conceived spontaneously 10 months after axicabtagene ciloleucel. At delivery, she had a B-cell count of zero. Her female infant had a low B-cell count and a low IgG at birth and was started on prophylactic penicillin V. She was discharged home well and was breastfed (extent and duration not stated). At 4 weeks of age, the infant was thriving; her B lymphocyte count had normalized, but she continued to have a low IgG. She met age appropriate developmental milestones, and her physical examination was normal. She received her routine vaccinations as per the Irish national schedule and continued penicillin V prophylaxis. At 6 months of age, the infant was thriving and developmentally appropriate. She had 12/12 pneumococcal serotype-specific antibody titers above the protective range of 0.35 mg/mL, Haemophilus influenzae type B IgG titer above the optimum protective level (5.76 mg/L), and a protective tetanus IgG antibody titer (1.65 IU/mL). At 11 months of age, her penicillin prophylaxis was stopped, and she was discharged from immunology follow-up. The mother conceived 34 months after axicabtagene ciloleucel. She had a normal B-cell count at delivery. Her infant had a normal B-cell count at birth and was partially breastfed (extent and duration not stated). The infant’s CD19 count on day 1 of life was also normal. No further follow-up was reported.[2]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Canty E, White A, Broderick L. A healthy pregnancy and newborn despite persistence of maternal CAR T-cells after cancer therapy. Ann Allergy Asthma Immunol 2024;133:S177-S78. doi:10.1016/j.anai.2024.08.692
2 O'Reilly D, Jones C, Smith A, et al. Neonatal outcomes following 2 cases of maternal CAR-T therapy for high-grade B-cell lymphoma. Neonatology 2025;122:146-50.39510057

## Substance Identification

### Substance Name

Axicabtagene Ciloleucel

### Drug Class

Breast Feeding

Lactation

Milk, Human

Immunotherapy, Adoptive

Antineoplastic Agents

Genetic Therapy